# Fusidic Acid

CASRN: 6990-06-3

## Drug Levels and Effects

### Summary of Use during Lactation

Fusidic acid is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries as topical and systemic dosage forms. Data on excretion of fusidic acid into breastmilk are quite old and not from a well-designed study, but levels in breastmilk after intravenous fusidic acid appear to be low.

With topical products, ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated. Only water-miscible cream or gel products should be applied to the breast because ointments may expose the infant to high levels of mineral paraffins via licking.[1] Fusidic acid applied topically to the nipples appears to be relatively ineffective as a treatment for sore, cracked nipples.

### Drug Levels

Maternal Levels. Seven women were given intravenous sodium fusidate 750 mg four times daily 4 hours apart on the first day of therapy. Milk samples taken at various times after the second dose had fusidic acid concentrations ranging from 0.005 to 0.86 mg/L.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A small, randomized, unblinded trial of mothers with sore, cracked nipples was performed. Fusidic acid ointment applied to the nipples after each feeding was much less effective (36% vs 79%) than an oral antibiotic (cloxacillin or erythromycin for 10 days) in resolving the problem. Additionally, 43% of patients had no improvement with fusidic acid compared with 16% with oral antibiotics; 21% worsened with fusidic acid compared with 5% with oral antibiotics.[3]

### References

1 Noti A, Grob K, Biedermann M, et al. Exposure of babies to C(15)-C(45) mineral paraffins from human milk and breast salves. Regul Toxicol Pharmacol 2003;38:317-25.14623482
2 Lauen O. Acute puerperal mastitis treated with Fucidin. Tidsskr Nor Laegeforen 1969;89:816-9.5793595
3 Livingstone V, Stringer LJ. The treatment of Staphyloccocus aureus infected sore nipples: A randomized comparative study. J Hum Lact 1999;15:241-6.10578803

## Substance Identification

### Substance Name

Fusidic Acid

### CAS Registry Number

6990-06-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibacterial Agents

Anti-Infective Agents

Protein Synthesis Inhibitors